# Florbetapir F 18

CASRN: 956103-76-7

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of florbetapir 18 as a diagnostic agent. No information is available on the use of florbetapir 18 during breastfeeding. The manufacturer recommends withholding breastfeeding for 24 hours after a diagnostic dose of 370 MBq (10 mCi). This length of time is greater than 10 half-lives of the radioisotope, so the nursing infant should not be exposed to radiation if this guideline is followed. The mother can nurse just before administration of the radiopharmaceutical. If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[1,2]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[3]

### Drug Levels

F18 is a positron emitter with a principal decay energy of 0.6335 MeV, annihilation photons of 0.511 MeV, and a physical half-life of 1.8 hours and 0.07% of an administered dose appears in breastmilk.[4]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mountford PJ, Coakley AJ. (1989). A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun.
2 Early PJ, Sodee DB. Principles and practice of nuclear medicine. 2nd ed. St Louis Mosby-Year Book, Inc 1995:1380-1.
3 Stabin MG, Breitz HB. (2000). Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med.
4 Leide-Svegborn S, Ahlgren L, Johansson L, et al. (2016). Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging.

## Substance Identification

### Substance Name

Florbetapir F 18

### CAS Registry Number

56103-76-7

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Fluorine Radioisotopes

Diagnostic Agents